# Sodium Phenylacetate and Sodium Benzoate

CASRN: 103-82-2; 65-85-0

SID: 403397365; 403029829

## Drug Levels and Effects

### Summary of Use during Lactation

Sodium phenylacetate and sodium benzoate have not been studied in nursing mothers, but sodium phenylacetate and sodium benzoate injection has been used as a treatment for acute hyperammonemia in pediatric patients in the early neonatal period. Predicted milk exposure from sodium benzoate is low. If a mother requires sodium phenylacetate and sodium benzoate, it is not a reason to discontinue breastfeeding.

### Drug Levels

Maternal Levels. A physiologically based pharmacokinetic model of sodium benzoate exposure of infants in utero and from breastfeeding during maternal therapy found the predicted 95^th^ percentile of neonatal exposure to be 14% on the first day of life from intrauterine exposure and less than 3% thereafter from breastfeeding.[1]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Wang S, Hamadeh A, Mian P, et al. Predicting cumulative neonatal sodium benzoate exposures during breastfeeding with physiologically based pharmacokinetic modelling. Clin Pharmacokinet 2026;65:665–80.41758461

## Substance Identification

### Substance Name

Sodium Phenylacetate and Sodium Benzoate

### CAS Registry Number

103-82-2; 65-85-0

### Drug Class

Breast Feeding

Lactation

Milk, Human

Phenylacetates

Sodium Benzoate